# Romiplostim

CASRN: 267639-76-9

## Drug Levels and Effects

### Summary of Use during Lactation

Romiplostim was detected in low levels in the breastmilk of one woman and in much lower levels in the serum of her infant. The infant had mild thrombocytosis that persisted after breastfeeding discontinuation, but no other medical complications. Information from another mother-infant pair found no short-term adverse effects after maternal romiplostim. Until more data become available, romiplostim should be used with careful infant monitoring of infant blood parameters during breastfeeding, especially while nursing a newborn or preterm infant. The manufacturer recommends avoiding breastfeeding during romiplostim therapy.

### Drug Levels

Maternal Levels. A woman with systemic lupus erythematosus and history of thrombosis and immune thrombocytopenia received romiplostim during pregnancy and postpartum in a dose of 120 mcg (2 mcg/kg) per week. A semiquantitative analysis of her milk found levels of romiplostim-associated amino acid sequences in her milk that were much higher than those in control milk from other mothers not taking romiplostim. At steady-state, the milk level was higher 1 day after the dose than 7 days after the dose.[1]

Infant Levels. A woman with systemic lupus erythematosus and history of thrombosis and immune thrombocytopenia received romiplostim during pregnancy and postpartum in a dose of 120 mcg (2 mcg/kg) per week. Her infant was breastfed and at 56 days postpartum, her blood level of romiplostim-associated amino acid sequences was 13.5 times higher than the infant’s blood level. The infant’s blood level was about the same as the level in breastmilk.[1]

### Effects in Breastfed Infants

A woman with chronic immune thrombocytopenic purpura had a low platelet count after delivery even after receiving 5 units of platelets on two consecutive days. She also received intravenous methylprednisolone 500 mg daily for 2 days and intravenous immune globulin 1 gram/kg with poor response. The patient was given romiplostim 2 mcg/kg and 90 mg of prednisone orally on the evening of postpartum day 2 at about 68 hours postpartum. She received a second dose of 2 mcg/kg romiplostim on the third postpartum day. Her platelet count increased and she was discharged on postpartum day 5. The patient elected to breastfeed her infant (extent not stated). No adverse effects were noted in the infant during the hospitalization.[2]

A woman with systemic lupus erythematosus and history of thrombosis and immune thrombocytopenia received romiplostim during pregnancy and postpartum in a dose of 120 mcg (2 mcg/kg) per week. On the day of delivery, the breastfed (extent not stated) neonate’s platelet count was normal. Breastfeeding was initiated after birth. On day 9 of life, thrombocytosis was first noted. The peak platelet count occurred on day 22 of life. The mother discontinued breastfeeding at about 11 weeks postpartum because of the thrombocytosis and the presence of rare immature cells on the infant’s peripheral blood smear, but with normal flow cytometry. Two weeks after stopping breastfeeding, no immature cells were identified and the platelet count improved but was still elevated. Mild thrombocytosis was seen up to 11 months of age. The authors felt that the persistent mild thrombocytosis after breastfeeding cessation indicated that romiplostim was not the sole cause of thrombocytosis. The infant had no other complications up to 22 months after delivery.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Labrecque AA, Roy S, Young D, et al. Romiplostim drug presence in pregnancy and lactation. Blood 2023;141:2537-40.36848631
2 Patras A, Figueroa R, Singh AP, et al. Romiplostim for management of refractory immune thrombocytopenic purpura in the immediate postpartum period. BMJ Case Rep 2020;13:e234335.32430352

## Substance Identification

### Substance Name

Romiplostim

### CAS Registry Number

267639-76-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Recombinant Fusion Proteins

Thrombopoietin